# Letermovir

CASRN: 917389-32-3

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of letermovir during breastfeeding. Because letermovir is 99% bound to plasma proteins, the amount in milk is likely to be very low. However, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Letermovir

### CAS Registry Number

917389-32-3

### Drug Class

- Breast Feeding
- Lactation
- Anti-Infective Agents
- Antiviral Agents